# Paroxetine

CASRN: 61869-08-7

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the low levels of paroxetine in breastmilk, amounts ingested by the infant are small and paroxetine has not been detected in the serum of most infants tested. Occasional mild side effects have been reported, especially in the infants of mothers who took paroxetine during the third trimester of pregnancy, but the contribution of the drug in breastmilk is not clear. . No adverse effects on development have been found in infants followed for up to 5 years of age. Most authoritative reviewers consider paroxetine one of the preferred antidepressants during breastfeeding.[1-7] Monitor breastfed infants for excess sedation, agitation, irritability, poor feeding and poor weight gain

Mothers taking an SSRI during pregnancy and postpartum may have more difficulty breastfeeding, although this might be a reflection of their disease state.[8] These mothers may need additional breastfeeding support. Breastfed infants exposed to an SSRI during the third trimester of pregnancy are at risk for neonatal withdrawal syndrome consisting of hypoglycemia, tremors, tachycardia, or hypotonia, and might be at a greater risk of readmission due to jaundice.[9,10]

### Drug Levels

Maternal Levels. In a pooled analysis of serum levels from published studies and 3 unpublished cases, the authors found 50 mothers taking an average daily dosage of 21 mg (range 10 to 50 mg) had an average milk paroxetine level of 28 mcg/L (range 0 to 153 mcg/L).[1] Using the average dosage and milk level data from this paper, an exclusively breastfed infant would receive an estimated 1.2% of the maternal weight-adjusted dosage of paroxetine.

From data in 6 mothers taking paroxetine in an average daily dosage of 20 mg (range 10 to 30 mg), the authors estimated that an exclusively breastfed infant would receive 1.4% of the maternal weight-adjusted dosage.[11]

At 2 months postpartum, 19 mothers taking an average of 25 mg of paroxetine daily had average milk levels of 13.5 mcg/L at random times after the previous dose. The authors estimated that an exclusively breastfed infant would receive 0.02 mg/kg of paroxetine daily.[12]

A woman had taken paroxetine 15 mg daily during pregnancy. She did not receive a dose in the 22.75 hours before delivery or on the day of delivery. She resumed paroxetine 15 mg daily 24 hours postpartum. At 3.75 hours after the third postpartum dose, her breastmilk paroxetine level was 371 mcg/L.[13]

Four nursing mothers who were 6.5 to 18.5 weeks postpartum were taking paroxetine in doses of 12.5 to 60 mg daily in addition to quetiapine for major depression postpartum. Breastmilk samples that were obtained at various times after the dose had undetectable (<9.9 mcg/L) levels of paroxetine in 3 mothers. One mother who was taking 50 mg daily had a milk paroxetine level of 255 mcg/L.[14]

A woman taking paroxetine 20 mg daily had a breastmilk paroxetine concentration below the lower limit of quantification (<20 mcg/L) at a time that was not stated.[15]

A nursing mother was taking paroxetine 20 mg daily. Foremilk and hindmilk samples taken at 4 weeks postpartum, 7 hours after a dose contained 16 mcg/L and 24 mcg/L, respectively.[16]

Five women treated with paroxetine 7 to 25 mg daily during the third trimester of pregnancy and during breastfeeding provided trough milk samples during the first week postpartum. Paroxetine was undetectable (<5 mcg/L) in the milk of 2 women taking 10 mg daily. In the other 3 women, milk levels ranged from 5.9 to 32.9 mcg/L, with calculated weight-adjusted percentage of maternal dosages ranging from 1.1 to 3.2%. These values might be inaccurate because of the timing of milk sample collection.[17]

Nine mothers taking paroxetine in an average dosage of 29 mg daily (range 5 to 40 mg daily) provided milk samples for analysis. Samples of milk from the complete emptying of one breast were collected 3 times over a 2-day period at predefined times between just before a dose and 14 hours after a dose, with each participant collecting samples at different times. The average milk concentration was 63 mcg/L resulting in an average infant daily dosage of 5 mcg/kg and a relative infant dosage of 2%.[18]

Infant Levels. Sixteen breastfed infants (2 about 50% breastfed; the others 95% or more breastfed) aged 6 to 13 weeks had undetectable (<1 mcg/L) paroxetine serum levels during maternal therapy with paroxetine in an average daily dosage of 18.75 mg (range 5 to 30 mg).[19]

In a pooled analysis of 40 mother-infant pairs from published and unpublished cases, the authors found that no infants had measurable paroxetine plasma levels.[1]

In 6 breastfed (extent not stated) infants aged 2 to 33 weeks whose mothers were taking paroxetine in an average daily dosage of 20 mg (range 10 to 30 mg), paroxetine was undetectable (<1.6 mcg/L) in all of the infants’ serum. One mother taking 20 mg daily and her infant were both poor metabolizers (homozygous for CYP2D6*4), yet no paroxetine was detectable in infant serum.[11]

At 2 months postpartum, the breastfed infants of 19 mothers taking an average of 25 mg of paroxetine daily had an average serum paroxetine level of 0.95 mcg/L which was 5% of the maternal serum level.[12]

Nine breastfed (extent not stated) infants with an average age of 1.7 months (range 1.5 to 9.0 months) whose mothers were taking an average paroxetine dosage of 29 mg daily (range 5 to 40 mg daily) had one blood sample taken for analysis. Their average serum level of paroxetine was <6 mcg/L (range <6 to 6.4 mcg/L).[18]

### Effects in Breastfed Infants

Agitation and difficulty feeding in one infant (age and other details not reported) that were possibly related to paroxetine in breastmilk were reported to the Australian Adverse Drug Reaction Advisory Committee.[20]

In a controlled cohort study of mothers who took paroxetine during pregnancy (diagnoses not reported), 36 mothers took paroxetine during the third trimester and breastfed their infants. Of these, 8 reported side effects in their infants including alertness (6), constipation (3), sleepiness (1), and irritability (1). There were no reports of side effects in the control group of mothers who breastfed and did not use paroxetine in the third trimester or during nursing. The relative contribution of transplacental and breastmilk acquisition of the drug could not be determined.[21]

In a study comparing the infants of mothers who took an SSRI during pregnancy for major depression with the infants of depressed mothers who did not take an SSRI, mental development and most motor development was normal at follow-up averaging 12.9 months in both groups. Four of the treated mothers took paroxetine in doses averaging 28.6 mg daily for an average of 7.8 months while breastfeeding (extent not stated) their infants. Psychomotor development was slightly delayed compared to controls, but the contribution of breastfeeding to abnormal development could not be determined.[22]

A prospective cohort study evaluated 27 infants whose mothers took paroxetine (diagnoses not reported) at an average dose of 20.7 mg daily for at least 2 weeks during breastfeeding (extent not stated). Two control groups consisted of two groups of mothers who neither breastfed nor took an SSRI. All but 7 of the 27 mothers took paroxetine during some part of pregnancy. Weight at 3 months was less in the paroxetine group, but multivariate analysis indicated that maternal paroxetine use was not the determining factor. Weights at 6 and 12 months were not different from the control groups and other developmental milestones were reached at the normal times. One of the paroxetine-exposed infants (age not stated) was reported by the mother to be irritable.[23]

Fifteen mothers who took an average paroxetine dosage of 20.4 mg daily for depression or anxiety starting no later than 4 weeks postpartum, breastfed their infants exclusively for 4 months and at least 50% during months 5 and 6. Their infants had 6-month weight gains that were normal according to national growth standards and mothers reported no abnormal effects in their infants.[24]

In 6 breastfed (extent not stated) infants aged 2 to 33 weeks whose mothers were taking paroxetine 10 to 30 mg daily, no adverse reactions were noted clinically at the time of the study.[11]

An infant born to a mother taking paroxetine had serum paroxetine levels about one-third that of the mother’s at birth. The infant was a genetic poor metabolizer, which apparently was the cause of the high serum levels. Although the infant had symptoms attributed to paroxetine obtained in utero, the mother continued taking paroxetine 30 mg daily and breastfeeding (extent not stated). At 4 months of age, the infant had gained weight normally and had no evidence of neurological side effects.[25]

An 18-month-old infant with a 2-week history of vomiting was found to have hypokalemia, hypochloremic alkalosis and mild dehydration. The infant had been admitted twice previously 2 and 3 months before with a similar picture. Serum renin and aldosterone were normal. The infant’s mother had been taking paroxetine 40 mg daily for about 1 year for depression and breastfeeding the infant (extent not stated). Paroxetine was detected, but not quantified, in the mother’s breastmilk and infant’s serum. Breastfeeding was discontinued and the infant was thriving 6 weeks later with a normal metabolic profile. The authors attributed the infant’s metabolic abnormalities to paroxetine-induced syndrome of inappropriate secretion of antidiuretic hormone.[26] The reaction was possibly caused by paroxetine in breastmilk, but strong evidence was lacking and other possible causes cannot be ruled out.

A small study compared the reaction to pain in infants of depressed mothers who had taken an SSRI during pregnancy alone or during pregnancy and nursing, to a control group of unexposed infants of nondepressed mothers. Infants exposed to an SSRI either prenatally alone or prenatally and postnatally via breastmilk had blunted responses to pain compared to control infants. Nineteen of the 30 infants were exposed to paroxetine. Because there was no control group of depressed, nonmedicated mothers, an effect due to maternal behavior caused by depression could not be ruled out. The authors stressed that these findings did not warrant avoiding drug treatment of depression during pregnancy or avoiding breastfeeding during SSRI treatment.[12]

One study of side effects of SSRI antidepressants in nursing mothers found no adverse reactions that required medical attention among 3 infants whose mother was taking paroxetine. No specific information on maternal paroxetine dosage, extent of breastfeeding or infant age was reported.[27]

A nursing mother with bipolar disorder began taking 20 mg of paroxetine at 4 months postpartum and then started on quetiapine 200 mg twice daily at 6 months postpartum. She breastfed regularly (extent not stated) and no obvious adverse effects were noted in the infant.[28]

Four nursing mothers who were 6.5 to 18.5 weeks postpartum were taking paroxetine in doses of 12.5 to 60 mg daily in addition to quetiapine for major depression postpartum. Their breastfed infants’ development were tested at 9 to 18 months of age with the Bayley Scales. Measurements were slightly low on the mental and psychomotor development scale in one infant and on the mental development scale in another; both infants had undetectable (<9.9 mcg/L) serum paroxetine levels. All other infants had scores that were within normal limits. The authors concluded that the low scores of the two infants were probably not caused by the drugs received by the infants in breastmilk.[14]

An uncontrolled online survey compiled data on 930 mothers who nursed their infants while taking an antidepressant. Infant drug discontinuation symptoms (e.g., irritability, low body temperature, uncontrollable crying, eating and sleeping disorders) were reported in about 10% of infants. Mothers who took antidepressants only during breastfeeding were much less likely to notice symptoms of drug discontinuation in their infants than those who took the drug in pregnancy and lactation.[29]

A cohort of 247 infants exposed to an antidepressant in utero during the third trimester of pregnancy were assessed for poor neonatal adaptation (PNA). Of the 247 infants, 154 developed PNA. Infants who were exclusively given formula had about 3 times the risk of developing PNA as those who were exclusively or partially breastfed. Forty-nine of the infants were exposed to paroxetine in utero.[30]

A retrospective study of 42 nursing mothers who had been seen at a psychiatric outpatient facility, followed for at least 8 weeks, and prescribed paroxetine found that adverse effects were reported in 5 (12%) of their infants. One mother was taking 10 mg daily and 4 mothers were taking 20 mg daily. The most commonly reported adverse events in the infants were insomnia and restlessness; constant crying and poor feeding were less commonly reported. All of the adverse effects developed within the first 2 weeks after initiation of maternal treatment and disappeared within the 3 days after drug discontinuation. Adverse effects disappeared in one infant after reducing the maternal dosage from 20 mg daily to 10 mg daily. There was no difference in prevalence of adverse effects between these infants and those in the same study whose mothers were prescribed sertraline.[31]

A mother who was exclusively breastfeeding a 2-month-old infant began taking paroxetine 20 mg daily for depression. After paroxetine was begun, the mother reported severe constipation in the infant, which resolved within 2 days after discontinuing paroxetine with no treatment. No abnormalities were seen on physical examination or laboratory tests. The infant had previously developed agitation and sleeplessness with maternal sertraline use. The infant subsequently tolerated maternal citalopram use.[32]

Five women were treated with paroxetine 7 to 25 mg daily during the third trimester of pregnancy and during breastfeeding. Pediatric evaluations including neurologic assessments and brain ultrasound were conducted during the first 24 hours postpartum. Further follow-up was conducted at 6 or more months of age. Infant clinical status was comparable to unexposed infants from the same pediatric department.[17]

A case series reported 8 women who received paroxetine 20 mg and mirtazapine 15 mg daily for various psychiatric disorders. The women breastfed (extent not stated) their infants who averaged 4.3 weeks of age. Follow-up of the infants after 3 to 6 weeks when mirtazapine was discontinued identified one infant who experienced restlessness after 5 days of therapy according to the mother. Discontinuation of mirtazapine had no effect, but the symptoms disappeared when paroxetine was discontinued. No other infants had other adverse effects observed.[33]

In a retrospective cohort study of 5,079 newborns whose mothers took an SSRI during pregnancy, 1.5% of breastfed newborns had neonatal withdrawal compared with 2.3% among the formula-fed newborns, although this did not reach statistical significance. Breastfed newborns had a reduced risk of transfer to the NICU than formula-fed newborns; however, this finding did not persist in sensitivity analysis. Five percent of women in the study were taking paroxetine.[34] A further analysis of these data indicated that infants of mothers who took a SSRI during pregnancy and exclusively breastfed had a greater risk of an emergency department visit or readmission to the hospital, primarily due to jaundice.[10]

A secondary analysis of a population study evaluated infant IQ scores with SSRI use postpartum during nursing (n = 22), non-SSRI exposed breastfed infants (n = 37), and non-breastfed infants (n = 38). Of the entire group of mothers, 81 mothers were treated with fluoxetine, 9 with sertraline, 8 with paroxetine, and 2 with citalopram. Children had IQ testing at a mean age of 4.9 years. There were no significant differences in any adjusted mean IQ scores between breastfed children with and without postnatal SSRI exposure.[35]

A pilot study compared the stool of breastfed infants whose mothers were taking an SSRI antidepressant to those of infants whose mothers were not taking an SSRI. None of the 10 women taking an SSRI were taking paroxetine. The stools of infants exposed to an SSRI in milk had increases in the genera Gemella, Staphylococcus and Corynebacterium and a decrease in Lactobacillus.[36]

### Effects on Lactation and Breastmilk

Paroxetine can cause galactorrhea, usually with increased prolactin levels, in nonpregnant, nonbreastfeeding patients.[37-46] In a study of cases of hyperprolactinemia and its symptoms (e.g., gynecomastia) reported to a French pharmacovigilance center, paroxetine was found to have a 3.1-fold increased risk of causing hyperprolactinemia compared to other drugs.[47] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

In a small prospective study, 8 primiparous women who were taking a serotonin reuptake inhibitor (SRI; 3 taking fluoxetine and 1 each taking citalopram, duloxetine, escitalopram, paroxetine or sertraline) were compared to 423 mothers who were not taking an SRI. Mothers taking an SRI had an onset of milk secretory activation (lactogenesis II) that was delayed by an average of 16.7 hours compared to controls (85.8 hours postpartum in the SRI-treated mothers and 69.1 h in the untreated mothers), which doubled the risk of delayed feeding behavior in the untreated group. However, the delay in lactogenesis II may not be clinically important, since there was no statistically significant difference between the groups in the percentage of mothers experiencing feeding difficulties after day 4 postpartum.[48]

A case control study compared the rate of predominant breastfeeding at 2 weeks postpartum in mothers who took an SSRI antidepressant throughout pregnancy and at delivery (n = 167) or an SSRI during pregnancy only (n = 117) to a control group of mothers who took no antidepressants (n = 182). Among the two groups who had taken an SSRI, 33 took citalopram, 18 took escitalopram, 63 took fluoxetine, 2 took fluvoxamine, 78 took paroxetine, and 87 took sertraline. Among the women who took an SSRI, the breastfeeding rate at 2 weeks postpartum was 27% to 33% lower than mother who did not take antidepressants, with no statistical difference in breastfeeding rates between the SSRI-exposed groups.[49]

An observational study looked at outcomes of 2859 women who took an antidepressant during the 2 years prior to pregnancy. Compared to women who did not take an antidepressant during pregnancy, mothers who took an antidepressant during all 3 trimesters of pregnancy were 37% less likely to be breastfeeding upon hospital discharge. Mothers who took an antidepressant only during the third trimester were 75% less likely to be breastfeeding at discharge. Those who took an antidepressant only during the first and second trimesters did not have a reduced likelihood of breastfeeding at discharge.[50] The antidepressants used by the mothers were not specified.

A retrospective cohort study of hospital electronic medical records from 2001 to 2008 compared women who had been dispensed an antidepressant during late gestation (n = 575; paroxetine n = 53) to those who had a psychiatric illness but did not receive an antidepressant (n = 1552) and mothers who did not have a psychiatric diagnosis (n = 30,535). Women who received an antidepressant were 37% less likely to be breastfeeding at discharge than women without a psychiatric diagnosis, but no less likely to be breastfeeding than untreated mothers with a psychiatric diagnosis.[51]

In a study of 80,882 Norwegian mother-infant pairs from 1999 to 2008, new postpartum antidepressant use was reported by 392 women and 201 reported that they continued antidepressants from pregnancy. Compared with the unexposed comparison group, late pregnancy antidepressant use was associated with a 7% reduced likelihood of breastfeeding initiation, but with no effect on breastfeeding duration or exclusivity. Compared with the unexposed comparison group, new or restarted antidepressant use was associated with a 63% reduced likelihood of predominant, and a 51% reduced likelihood of any breastfeeding at 6 months, as well as a 2.6-fold increased risk of abrupt breastfeeding discontinuation. Specific antidepressants were not mentioned.[52]

### Alternate Drugs to Consider

Nortriptyline, Sertraline

### References

1 Weissman AM, Levy BT, Hartz AJ, . Pooled analysis of antidepressant levels in lactating mothers, breast milk, and nursing infants. Am J Psychiatry 2004;161:1066-78.15169695
2 The Academy of Breastfeeding Medicine Protocol Committee. ABM clinical protocol #18: Use of antidepressants in nursing mothers. Breastfeed Med 2008;3:44-52.18333769
3 Lanza di Scalea T, Wisner KL. Antidepressant medication use during breastfeeding. Clin Obstet Gynecol 2009;52:483-97.19661763
4 Berle JO, Spigset O. Antidepressant use during breastfeeding. Curr Womens Health Rev 2011;7:28-34.22299006
5 Orsolini L, Bellantuono C. Serotonin reuptake inhibitors and breastfeeding: A systematic review. Hum Psychopharmacol 2015;30:4-20.25572308
6 Larsen ER, Damkier P, Pedersen LH, . Use of psychotropic drugs during pregnancy and breast-feeding. Acta Psychiatr Scand Suppl 2015;445:1-28.
7 Uguz F. A new safety scoring system for the use of psychotropic drugs during lactation. Am J Ther 2021;28:e118-e26.30601177
8 Grzeskowiak LE, Leggett C, Costi L, . Impact of serotonin reuptake inhibitor use on breast milk supply in mothers of preterm infants: A retrospective cohort study. Br J Clin Pharmacol 2018;84:1373-9.29522259
9 Wang J, Cosci F. Neonatal withdrawal syndrome following late in utero exposure to selective serotonin reuptake inhibitors: A systematic review and meta-analysis of observational studies. Psychother Psychosom 2021;90:299-307.33971648
10 Cantin C, Li W, Snelgrove-Clarke E, . Examining the effect of newborn feeding method on postnatal length of stay and healthcare utilisation among Neonates With In-utero SSRI Exposure (NeoWISE): a retrospective cohort study. BMJ Paediatr Open 2026;10
11 Berle JØ, Steen VM, Aamo TO, . Breastfeeding during maternal antidepressant treatment with serotonin reuptake inhibitors: Infant exposure, clinical symptoms, and cytochrome P450 genotypes. J Clin Psychiatry 2004;65:1228-34.15367050
12 Oberlander TF, Grunau RE, Fitzgerald C, . Pain reactivity in 2-month-old infants after prenatal and postnatal serotonin reuptake inhibitor medication exposure. Pediatrics 2005;115:411-25.15687451
13 Knoppert DC, Nimkar R, Principi T, . Paroxetine toxicity in a newborn after in utero exposure: clinical symptoms correlate with serum levels. Ther Drug Monit 2006;28:5-7.16418684
14 Misri S, Corral M, Wardrop AA, . Quetiapine augmentation in lactation: A series of case reports. J Clin Psychopharmacol 2006;26:508-11.16974194
15 Salazar FR, D’Avila FB, de Oliveira MH, . Development and validation of a bioanalytical method for five antidepressants in human milk by LC-MS. J Pharm Biomed Anal 2016;129:502-8.27497651
16 Weisskopf E, Panchaud A, Nguyen KA, . Simultaneous determination of selective serotonin reuptake inhibitors and their main metabolites in human breast milk by liquid chromatography-electrospray mass spectrometry. J Chromatogr B Analyt Technol Biomed Life Sci 2017;1057:101-9.
17 Pogliani L, Baldelli S, Cattaneo D, . Selective serotonin reuptake inhibitors passage into human milk of lactating women. J Matern Fetal Neonatal Med 2019;32:3020-5.29557689
18 Den Besten-Bertholee D, Touw DJ, Damer EA, . Sertraline, citalopram and paroxetine in lactation: Passage into breastmilk and infant exposure. Front Pharmacol 2024;15:1414677.38841362
19 Hendrick V, Fukuchi A, Altshuler L, . Use of sertraline, paroxetine and fluvoxamine by nursing women. Br J Psychiatry 2001;179:163-6.11483479
20 Rohan A. Drug distribution in human milk. Aust Prescr 1997;20:84.
21 Costei AM, Kozer E, Ho T, . Perinatal outcome following third trimester exposure to paroxetine. Arch Pediatr Adolesc Med 2002;156:1129-32.12413342
22 Casper RC, Fleisher BE, Lee-Ancajas JC, . Follow-up of children of depressed mothers exposed or not exposed to antidepressant drugs during pregnancy. J Pediatr 2003;142:402-8.12712058
23 Merlob P, Stahl B, Sulkes J. Paroxetine during breast-feeding: Infant weight gain and maternal adherence to counsel. Eur J Pediatr 2004;163:135-9.14745552
24 Hendrick V, Smith LM, Hwang S, . Weight gain in breastfed infants of mothers taking antidepressant medications. J Clin Psychiatry 2003;64:410-2.12716242
25 Laine K, Kytola J, Bertilsson L. Severe adverse effects in a newborn with two defective CYP2D6 alleles after exposure to paroxetine during late pregnancy. Ther Drug Monit 2004;26:685-7.15570195
26 Abdul Aziz A, Agab WA, Kalis NN. Severe paroxetine induced hyponatremia in a breast fed infant. J Bahrain Med Soc 2004;16:195-8.
27 Lee A, Woo J, Ito S. Frequency of infant adverse events that are associated with citalopram use during breast-feeding. Am J Obstet Gynecol 2004;190:218-21.14749663
28 Ritz S. Quetiapine monotherapy in post-partum onset bipolar disorder with a mixed affective state. Eur Neuropsychopharmacol 2005;15 (Suppl 3):S407. doi:10.1016/S0924-977X(05)80825-9
29 Hale TW, Kendall-Tackett K, Cong Z, . Discontinuation syndrome in newborns whose mothers took antidepressants while pregnant or breastfeeding. Breastfeed Med 2010;5:283-8.20807106
30 Kieviet N, Hoppenbrouwers C, Dolman KM, . Risk factors for poor neonatal adaptation after exposure to antidepressants in utero. Acta Paediatr 2015;104:384-91.25559357
31 Uguz F, Arpaci N. Short-term safety of paroxetine and sertraline in breastfed infants: A retrospective cohort study from a university hospital. Breastfeed Med 2016;11:487-9.27575664
32 Uguz F. Better tolerance of citalopram in a breastfed infant who could not tolerate sertraline and paroxetine. Breastfeed Med 2018;13:89-90.29185803
33 Uguz F. Short-term safety of paroxetine plus low-dose mirtazapine during lactation. Breastfeed Med 2019;14:131-2.30489153
34 Cantin C, Li W, Snelgrove-Clarke E, . Neonates With In-Utero SSRI Exposure (NeoWISE): A retrospective cohort study examining the effect of newborn feeding method on newborn withdrawal. Int J Popul Data Sci 2024;9:2458.39679336
35 Heinonen EW, Kao K, Mattson SN, . Cognitive outcomes of children exposed to selective serotonin reuptake inhibitors through breast milk. JAMA Netw Open 2025;8:e2544989.41269692
36 Desorcy-Scherer K, McNamara K, Luellwitz R, . Early insights into maternal antidepressant use and the human infant gut microbiome. Biol Res Nurs 2026;28:406-17.41652998
37 Davenport E, Velamoor R. A case of paroxetine-induced galactorrhea. Can J Psychiatry 2002;47:890-1.12500767
38 Morrison J, Remick RA, Leung M, . Galactorrhea induced by paroxetine. Can J Psychiatry 2001;46:88-9.11221498
39 Bonin B, Vandel P, Sechter D, . Paroxetine and galactorrhea. Pharmacopsychiatry 1997;30:133-4.9271780
40 González E, Minguez L, Sanguino RM. Galactorrhea after paroxetine treatment. Pharmacopsychiatry 2000;33:118.10855465
41 Egberts AC, Meyboom RH, De Koning FH, . Non-puerperal lactation associated with antidepressant drug use. Br J Clin Pharmacol 1997;44:277-81.9296322
42 Chakraborty S, Sanyal D, Bhattacharyya R, . A case of paroxetine-induced galactorrhoea with normal serum prolactin level. Indian J Pharmacol 2010;42:322-3.21206628
43 Sertcelik S, Bakim B, Karamustafalioglu O. High dose paroxetine-induced galactorrhea with normal serum prolactin level: A case report. Bull Clin Psychopharmacol 2012;22:355-6. doi:10.5455/bcp.20120812015108
44 Kumar PNS, Gopalakrishnan A. Paroxetine induced galactorrhoea - A case report. Asian J Psychiatr 2018;34:31-2.29631147
45 Mishra S, Nath S, Mishra BR, . Euprolactinemic galactorrhea with paroxetine: Exploring the missing link. Indian J Psychol Med 2019;41:395-7.31391677
46 Bhattacharjee S, Biswas R, Mandal N. Selective serotonin reuptake inhibitor-induced galactorrhea with hyperprolactinemia. Indian J Psychiatry 2021;63:613-6.35136264
47 Trenque T, Herlem E, Auriche P, . Serotonin reuptake inhibitors and hyperprolactinaemia: A case/non-case study in the French pharmacovigilance database. Drug Saf 2011;34:1161-6.22077504
48 Marshall AM, Nommsen-Rivers LA, Hernandez LL, . Serotonin transport and metabolism in the mammary gland modulates secretory activation and involution. J Clin Endocrinol Metab 2010;95:837-46.19965920
49 Gorman JR, Kao K, Chambers CD. Breastfeeding among women exposed to antidepressants during pregnancy. J Hum Lact 2012;28:181-8.22344850
50 Venkatesh KK, Castro VM, Perlis RH, . Impact of antidepressant treatment during pregnancy on obstetric outcomes among women previously treated for depression: An observational cohort study. J Perinatol 2017;37:1003-9.28682318
51 Leggett C, Costi L, Morrison JL, . Antidepressant use in late gestation and breastfeeding rates at discharge from hospital. J Hum Lact 2017;33:701-9.28984528
52 Grzeskowiak LE, Saha MR, Nordeng H, . Perinatal antidepressant use and breastfeeding outcomes: Findings from the Norwegian Mother, Father and Child Cohort Study. Acta Obstet Gynecol Scand 2022;101:344-54.35170756

## Substance Identification

### Substance Name

Paroxetine

### CAS Registry Number

61869-08-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antidepressive Agents

Serotonin Uptake Inhibitors